# Caraway

## Drug Levels and Effects

### Summary of Use during Lactation

Caraway (Carum carvi) seeds contain numerous volatile oils, the most prominent being carvone and limonene. Caraway is a purported galactogogue,[1-7] but it has also been used to decrease breastmilk oversupply in Persian traditional medicine.[8] Maternal use has been advocated to reduce colic in the breastfed infant.[9] No scientifically valid clinical trials support these uses, although one small, old study found no galactogogue effect. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[10] Two studies found small, but measurable amounts of d-carvone in the milk of mothers given the chemical experimentally. Caraway is "generally recognized as safe" by the U.S. Food and Drug Administration. It is usually well tolerated, with the primary side effects being gastrointestinal such as heartburn, eructation, flatulence, and nausea. In two studies nursing mothers were given d-carvone. No adverse effects were noted in mothers or infants.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Eighteen lactating women were given 100 mg of d-carvone mixed with lactose and talc in a capsule on 3 test days. Milk samples were collected every 2 hours for 8 hours starting at the time of ingestion. Carvone was detected in milk at all collection times, with the average concentrations of 1.3 mcg/L at 0 hours, 7.2 mcg/L at 2 hours, 5.6 mcg/L at 4 hours, 4.3 mcg/L at 6 hours and 2.7 mcg/L at 8 hours after the dose. The average peak carvone concentration in milk was 10.5 mcg/L. Carvone metabolites were not detected in any milk samples.[11]

In another study, 20 mothers consumed 30 mg of d-carvone in 75 grams of hummus every third day for 28 days (10 exposures) at about 2 hours before a "usual" nursing time. Breastmilk samples were obtained 2 hours after ingestion on the first and last days of carvone intake. Carvone was detectable in the milk of 18 mothers. Average carvone concentrations in breastmilk were 2.5 mcg/L and 3.8 mcg/L on the first and last days of sampling, respectively. However, these values did not differ statistically, and the combined average carvone concentration was 3.2 mcg/L. A control group of 20 women who did not ingest d-carvone had no detectable carvone in their breastmilk.[12]

Five women who were nursing infants between 6 and 55 weeks of age drank 950 mL of fennel-anise-caraway tea (Messmer Ostfriesische Tee Gesellschaft Laurens Spethmann GmbH & Co. KG, Seevetal, Germany). The main odorant components of the tea are the following terpenes: limonene, 1,8-cineole, fenchone, estragole, carvone, trans-anethole, p-anisaldehyde and anisketone. Mothers collected milk samples at 30 minutes, 1 and 2 hours after ingesting the tea. Ingestion of the tea did not increase the overall terpene content of the milk, but there was wide variation from mother to mother. Some mothers had high background levels of some terpenes, probably from other foods or personal care products. In addition, a sensory panel found no significant change in the odor profile of the breastmilk samples compared to blank samples.[13]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[14]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study compared 3 groups of women. One group of 20 nursing mothers consumed 30 mg of d-carvone in 75 grams of hummus every third day for 28 days (10 exposures) at about 2 hours before a "usual" nursing time. A second group of 20 nursing mothers followed the same regimen, but their hummus contained no d-carvone. A third group of 8 mother received the d-carvone flavored hummus, but were exclusively formula feeding their infants. After this 28-day period, both groups of breast-fed infants showed greater acceptance of d-carvone-flavored mashed potatoes than the formula-fed infants who preferred the unflavored potatoes. The authors interpreted these results to mean that breastfed infants are more receptive to a wide array of flavors than formula-fed infants.[12]

### Effects on Lactation and Breastmilk

A group of 5 nursing mothers were given no herb for 5 days, 15 mL of a 10% infusion of caraway seeds 3 times daily for 10 days, followed by another 5-day control period from days 15 to 20. Their diet and environment were kept constant during the study period. Milk volume was measured daily and milk fat percentage was measured on days 5, 10, 15 and 20. No effect on milk volume or percentage of fat was seen.[15] Because of the lack of randomization, blinding and controls, and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of caraway.

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as melissa, caraway, anise, fennel, goat's rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mothers used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[16] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

### References

1 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93–100. doi:10.1089/act.1997.3.93
2 Kopec K. Herbal medications and breastfeeding. J Hum Lact 1999;15:157–61.10578793
3 Hardy ML. Women's health series: Herbs of special interest to women. J Am Pharm Assoc (Wash) 2000;40:234–42.10730024
4 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54–8.19161049
5 Alachkar A, Jaddouh A, Elsheikh MS, et al. Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun 2011;6:79–84.21366051
6 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
7 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
8 Kabiri M, Kamalinejad M, Sohrabvand F, et al. Management of breast milk oversupply in traditional Persian medicine. J Evid Based Complementary Altern Med 2017;22:1044–50.28817945
9 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165–7.9456733
10 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
11 Hausner H, Bredie WL, Mølgaard C, et al. Differential transfer of dietary flavour compounds into human breast milk. Physiol Behav 2008;95:118–24.18571209
12 Hausner H, Nicklaus S, Issanchou S, et al. Breastfeeding facilitates acceptance of a novel dietary flavour compound. Clin Nutr 2010;29:141–8.19962799
13 Denzer MY, Kirsch F, Buettner A. Are odorant constituents of herbal tea transferred into human milk? J Agric Food Chem 2015;63:104–11.25436940
14 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
15 Nikolov P, Avramov NR. Investigations on the effect of Foeniculum vulgare, Carum carvi, Anisum vulgare, Crataegus oxyacanthus, and Galga officinalis on lactation. Izv Meditsinskite Inst Bulg Akad Naukite Sofia Otd Biol Meditsinski Nauki 1951;1:169–82.14888359
16 Özalkaya E, Aslandogdu Z, Ozkoral A, et al. Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38–42.29411721

## Substance Identification

### Substance Name

Caraway

### Scientific Name

Carum carvi

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal